# Gallium Ga 68 Dotatate

CASRN: 459831-08-4

## Drug Levels and Effects

### Summary of Use during Lactation

Gallium Ga 68 dotatate is used for localization of somatostatin receptor positive neuroendocrine tumors. It can found in lactating breasts in higher than usual amounts.[1] Labeling in the U.S. advises nursing mothers to pump and discard breastmilk for 12 hours after a dose, based on isotope's physical half-life alone. However, one group of investigators and the International Atomic Energy Agency recommend pumping and discarding breastmilk for 4 hours after a dose of 100 to 200 MBq, then resuming breastfeeding.[2,3]

Mothers concerned about the level of radioactivity in their milk could ask to have it tested at a nuclear medicine facility at their hospital. When the radioactivity is at a safe level, she may resume breastfeeding. A method for measuring milk radioactivity and determining the time when a mother can safely resume breastfeeding has been published.[4]

Nursing mothers should not work with radioactive substances used in PET scans in their workplace.[5]

### Drug Levels

Ga 68 decays primarily by positron-emission with a half-life 68 minutes and a mean energy of 836 keV followed by photonic annihilation radiations of 511 keV.[6]

Maternal Levels. A nursing mother who was 7 months postpartum was administered 200 MBq of Ga68 dotatate for quantitative PET-CT imaging. An expressed breastmilk sample at about 90 minutes post injection contained 2.8 kBq of gallium 68. The authors calculated that the effective dose of radiation to the infant would be 1.03 mSv if it were fed at 4 hours after the dose, and 12 mSv if it were fed immediately after injection. They recommend avoiding breastfeeding for 4 hours after the dose, pumping and discarding the milk, then resuming breastfeeding.[2]

A woman received an injection of 150 MBq of Ga 68 dotatate for a PET scan. Milk samples were measured at 80 and 135 minutes after administration. The authors estimated that the infant would receive an effective dose of 0.014mSv if the patient resumed breastfeeding 80 minutes after administration. If a 4-hour interruption in breastfeeding were used, the infant would potentially receive 0.003 mSv.[7]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Aksoy SY, Vatankulu B, Akgün E, et al. Breast uptake of Ga-68 DOTA-TATE in a nursing woman with NET diagnosis. Gazi Med J 2016;27:176-7. doi:10.12996/gmj.2016.55
2 Forwood NJ, Kanthan GL, Bailey DL, et al. 68Ga-dotatate breast uptake and expression in breast milk. Clin Nucl Med 2016;41:654-5.27276203
3 International Atomic Energy Agency. Radiation Protection and Safety in Medical Uses of Ionizing Radiation, IAEA Safety Standards Series No. SSG-46, IAEA, Vienna. 2018. https://www.iaea.org/publications/11102/radiation-protection-and-safety-in-medical-uses-of-ionizing-radiation
4 Stabin MG, Breitz HB. Breast milk excretion of radiopharmaceuticals: Mechanisms, findings, and radiation dosimetry. J Nucl Med 2000;41:863-73.10809203
5 Almén A, Mattsson S. Radiological protection of foetuses and breast-fed children of occupationally exposed women in nuclear medicine - Challenges for hospitals. Phys Med 2017;43:172-7.28882410
6 Dilsizian V, Metter D, Palestro C, et al. Advisory Committee on Medical Uses of Isotopes (ACMUI) Sub-Committee on Nursing Mother Guidelines for the Medical Administration of Radioactive Material. Final report submitted: January 31, 2019. 2019. https://www.nrc.gov/docs/ML1903/ML19038A498.pdf
7 O'Mahoney E, Chacko A, Mcgill G, et al. (68)Ga-dotatate expression in breastmilk and the potential dose to the breastfeeding infant. Intern Med J 2019;49:25. doi:10.1111/imj.14678

## Substance Identification

### Substance Name

Gallium Ga 68 Dotatate

### CAS Registry Number

459831-08-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Diagnostic Agents

Radiopharmaceuticals

Gallium Radioisotopes